# Trifarotene

CASRN: 895542-09-3

## Drug Levels and Effects

### Summary of Use during Lactation

Trifarotene has not been studied during breastfeeding. Because it is poorly absorbed after topical application, it is a low risk to the nursing infant. Do not apply trifarotene cream directly to the nipple and areola and ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Azelaic Acid, Benzoyl Peroxide, Clindamycin, Erythromycin

## Substance Identification

### Substance Name

Trifarotene

### CAS Registry Number

895542-09-3

### Drug Class

Breast Feeding

Lactation

Dermatologic Agents

Retinoids